# Aspirin

CASRN: 50-78-2

## Drug Levels and Effects

### Summary of Use during Lactation

After aspirin ingestion, salicylic acid is excreted into breastmilk, with higher doses resulting in disproportionately higher milk levels. Long-term, high-dose maternal aspirin ingestion probably caused metabolic acidosis in one breastfed infant. Reye's syndrome is associated with aspirin administration to infants with viral infections, but the risk of Reye's syndrome from salicylate in breastmilk is unknown. An alternate drug is preferred over continuous high-dose, aspirin therapy. With low-dose aspirin (75 to 325 mg daily), no aspirin is excreted into breastmilk and salicylate levels are low. If a nursing mother uses aspirin, monitor the infant for bruising and bleeding.

### Drug Levels

Aspirin is rapidly metabolized to salicylate after ingestion, so most studies have measured salicylate levels in breastmilk after aspirin administration to the mother; however, some studies have not measured salicylate metabolites in breastmilk that may be hydrolyzed in the infant's gut and absorbed as salicylate.[1]

Maternal Levels. A woman taking aspirin 4 grams daily for rheumatoid arthritis was nursing her 5 kg infant (age not reported). Salicylate was not detectable (<50 mg/L) in breastmilk with the relative insensitive assay used.[2]

Six nursing mothers who were 2 to 8 months postpartum (average 5 months) were given aspirin doses of 500, 1000 and 1500 mg of aspirin orally on 3 separate occasions. Peak breastmilk salicylate levels were 5.8 mg/L, 15.8 mg/L, and 38.8 mg/L, respectively. The time of the peak levels occurred between 2 and 6 hours after ingestion, with little variation in levels over time. The disproportionate increase in milk levels as the dose increased was attributed to nonlinear metabolism and protein binding.[3]

Milk and blood levels of salicylate and its metabolites were determined in 8 lactating women following oral administration of 1 gram of aspirin. Peak salicylic acid milk levels averaging 2.4 mg/L occurred 3 hours after the dose. Milk contents of salicyluric acid were greater than those of salicylic acid; a mean peak level of 10.2 mg/L was reached after 9 hours, and the average level was 4.4 mg/L at 24 hours after the dose. Total salicylate and metabolite levels were 5.1 mg/L at 3 hours, 9.9 mg/L at 6 hours, 11.2 mg/L at 9 hours and 10.2 mg/L at 12 hours after the dose. Acid labile conjugates were less than 0.2 mg/L.[4] Using an average salicylate plus salicyluric acid level over the first 12 hours, a fully breastfed infant would receive an average of 9.4% of the maternal weight-adjusted dosage.

Two women given aspirin 454 mg orally had peak salicylate milk levels of about 1 mg/L at 1 hour after the dose. The authors estimated that about 0.1% of the mothers' total dose would appear in breastmilk in 48 hours.[5] However, salicylate metabolites were not measured in milk.

A woman who was breastfeeding a 4-month-old was taking long-term aspirin therapy in dosages ranging from 2 to 5.9 grams daily. During this therapy, milk was obtained 4 hours after a 650 mg dose and just before taking a dose of 975 mg. The trough milk salicylate level was 2 mg/L, and a peak level of 10 mg/L occurred 3 hours after the dose. Salicylate levels ranged from 4 to 7 mg/L over the 5 hours after the peak.[6] Using the peak level from this study, a fully breastfed infant would receive about 10% of the maternal weight-adjusted dosage of salicylate. The assay method used should have measured both salicylate and metabolites in milk.

Seven nursing mothers between 1 and 8 months postpartum were taking enteric-coated aspirin daily; six took 81 mg and one took 325 mg. Aliquots of a complete collection of milk from both breasts were analyzed for aspirin and salicylic acid 6 times over the following 24-hour period. Aspirin was undetectable (<0.61 mcg/L) in all samples. In mothers taking 81 mg of aspirin daily, the peak salicylate concentration in milk was 115 mcg/L at 2 to 4 hours after the dose and the average milk concentration was 24 mcg/L. In the woman taking 325 mg of aspirin, the peak milk salicylate concentration was 745 mcg/L at 1 hour after the dose and the average salicylate concentration was 107.4 mcg/L. The authors calculated a weight-adjusted infant salicylate dosage of 0.4%.[7]

Infant Levels. A 9-week-old infant who was born at 36 weeks gestation was receiving about 50% breastmilk and 50% formula. The infant's mother was taking 2.4 grams of aspirin daily and the infant's serum contained 65 mg/L of salicylate.[8]

A 16-day-old infant developed metabolic acidosis with a salicylate serum level of 240 mg/L and salicylate metabolites in the urine. The possibility of direct administration to the infant could not be ruled out.[9]

### Effects in Breastfed Infants

One case report of metabolic acidosis was caused by salicylate in a 16-day old breastfed infant whose mother was taking aspirin 650 mg every 4 hours for arthritis.[9] However, there was no measurement of salicylate in maternal serum or milk and it is unclear whether the infant had received any salicylate directly.

Thrombocytopenia, fever, anorexia and petechiae occurred in a 5-month-old breastfed infant 5 days after her mother started taking aspirin for fever. One week after recovery, the infant was given a single dose of aspirin 125 mg and the platelet count dropped once again. The original symptoms were probably caused by aspirin or salicylate in breastmilk.[10]

Hemolysis after aspirin and phenacetin taken by the mother of a 23-day-old, glucose-6-phosphate dehydrogenase (G6PD) deficient infant was possibly due to aspirin in breastmilk.[11]

In a telephone follow-up study, mothers reported no side effects among 15 infants exposed to aspirin (dosages and infant ages were unspecified) in breastmilk.[12]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Levy G. Salicylate pharmacokinetics in the human neonate. In: Morselli P, Garattini S, Sereni F, eds. Basic and therapeutic aspects of perinatal pharmacology. New York: Raven Press; 1975:319-30.
2 Erickson SH, Oppenheim GL. Aspirin in breast milk. J Fam Pract 1979;8:189-90.759544
3 Jamali F, Keshavarz E. Salicylate excretion in breast milk. Int J Pharm 1981;8:285-90. doi:10.1016/0378-5173(81)90068-5
4 Pütter J, Satravaha P, Stockhausen H. Quantitative analysis of the main metabolites of acetylsalicylic acid. Comparative analysis in the blood and milk of lactating women. Z Geburtshilfe Perinatol 1974;178:135-8.4422623
5 Findlay JW, DeAngelis RL, Kearney MF, et al. Analgesic drugs in breast milk and plasma. Clin Pharmacol Ther 1981;29:625-33.7214793
6 Bailey DN, Welbert RT, Naylor A. A study of salicylate and caffeine excretion in the breast milk of two nursing mothers. J Anal Toxicol 1982;6:64-8.7098450
7 Datta P, Rewers-Felkins K, Kallem RR, et al. Transfer of low dose aspirin into human milk. J Hum Lact 2017;33:296-9.28418802
8 Unsworth J, d'Assis-Fonseca A, Beswick DT. Serum salicylate levels in a breast fed infant. Ann Rheum Dis 1987;46:638-9.3662653
9 Clark JH, Wilson WG. A 16-day-old breast-fed infant with metabolic acidosis caused by salicylate. Clin Pediatr (Phila) 1981;20:53-4.7449246
10 Terragna A, Spirito L. Thrombocytopenic purpura in an infant after administration of acetylsalicylic acid to the wet-nurse. Minerva Pediatr 1967;19:613-6.6069440
11 Harley JD, Robin H. "Late" neonatal jaundice in infants with glucose-6-phosphate dehydrogenase-deficient erythrocytes. Australas Ann Med 1962;11:148-55.13960788
12 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418

## Substance Identification

### Substance Name

Aspirin

### CAS Registry Number

50-78-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-Inflammatory Agents, Non-Steroidal

Platelet Aggregation Inhibitors